# Buspirone

CASRN: 36505-84-7

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that maternal doses of buspirone up to 45 mg daily produce low levels in milk. Because no information is available on the long-term use of buspirone during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. A woman was taking buspirone 15 mg 3 times daily during pregnancy and postpartum. On day 13 postpartum, buspirone was undetectable in breastmilk by HPLC assay (limit of detection and time of sample not stated).[1]

Nine women taking buspirone 7.5 to 30 mg twice daily donated milk samples collected at 1, 2, 4, 6, 8, 10, and 12 hours after a dose to a human milk repository. Levels of buspirone and its active metabolite 1-(2-pyrimidinyl) piperazine were measured. Buspirone was not detected (<1.5 mcg/L) in any samples, but the metabolite was found in all samples. The relative infant dose was estimated to average 0.91% (range 0.21 to 2.17%).[2]

Infant Levels. In the exclusively breastfed infant of a mother who was taking buspirone 15 mg 3 times daily, buspirone was undetectable in the infant's serum by HPLC assay (limit of detection and time of sample not stated) on days 13 and 21 postpartum.[1]

### Effects in Breastfed Infants

Possible drug-induced seizure-like activity and cyanosis occurred in a breastfed 3-week-old whose mother was taking buspirone 15 mg 3 times daily as well as fluoxetine and carbamazepine during pregnancy and breastfeeding. The authors thought that this reaction, if drug induced, was most likely caused by fluoxetine.[1]

One exclusively breastfed 11-week-old infant was breastfed during maternal therapy with buspirone 10 mg daily and venlafaxine 300 mg daily. No adverse reactions were reported by the mother or in the medical records.[3]

### Effects on Lactation and Breastmilk

Buspirone increases serum prolactin.[4-7] Galactorrhea was reported in a woman taking venlafaxine after buspirone was added to her regimen. However, when buspirone was discontinued, galactorrhea persisted.[8] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

Lorazepam, Oxazepam

### References

1 Brent NB, Wisner KL. Fluoxetine and carbamazepine concentrations in a nursing mother/infant pair. Clin Pediatr (Phila) 1998;37:41-4 9475699
2 Krutsch K, Campbell L, Baker T, et al. Alleviating anxiety while breastfeeding: evaluating buspirone transfer into human milk. Arch Womens Ment Health 2024;27:619–23 38376615
3 Newport DJ, Ritchie JC, Knight BT, et al. Venlafaxine in human breast milk and nursing infant plasma: Determination of exposure. J Clin Psychiatry 2009;70:1304-10 19607765
4 Bridge MW, Marvin G, Thompson CE, et al. Quantifying the 5-HT1a agonist action of buspirone in man. Psychopharmacology (Berl) 2001;158:224-9 11713611
5 Gómez-Gil E, Navinés R, Martínez De Osaba, MJ, et al. Hormonal responses to the 5-HT1a agonist buspirone in remitted endogenous depressive patients after long-term imipramine treatment. Psychoneuroendocrinology 2010;35:481-9 19762159
6 Maskall DD, Zis AP, Lam RW, et al. Prolactin response to buspirone challenge in the presence of dopaminergic blockade. Biol Psychiatry 1995;38:235-9 8547445
7 Navinés R, Gómez-Gil E, Martin-Santos R, et al. Hormonal response to buspirone is not impaired in major depression. Hum Psychopharmacol 2007;22:389-95 17563921
8 Sternbach H. Venlafaxine-induced galactorrhea. J Clin Psychopharmacol 2003;23:109-10 12544389

## Substance Identification

### Substance Name

Buspirone

### CAS Registry Number

36505-84-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Anxiety Agents

Serotonin Agonists